# Etripamil

CASRN: 1593673-23-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of etripamil during breastfeeding. Because of a lack of safety information, the manufacturer recommends avoiding breastfeeding for 12 hours after intranasal use.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Etripamil

### CAS Registry Number

1593673-23-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Calcium Channel Blockers